# Nadolol

CASRN: 42200-33-9

## Drug Levels and Effects

### Summary of Use during Lactation

There are reports of safe use of nadolol during exclusive breastfeeding. However, because of its relatively extensive excretion into breastmilk and its renal excretion other beta-adrenergic blocking drugs are preferred to nadolol, especially while nursing a newborn or preterm infant.

### Drug Levels

The excretion of beta-adrenergic blocking drugs into breastmilk is largely determined by their protein binding. Those with low binding are more extensively excreted into breastmilk.[1] Accumulation of the drugs in the infant is related to the fraction excreted in urine. With 25% protein binding, 70% renal excretion and long half-life, nadolol presents a high risk for accumulation in infants, especially neonates. It is estimated that a fully breastfed infant would receive about 5.1% of the maternal weight-adjusted dosage of nadolol.[2]

Maternal Levels. One mother received nadolol 20 mg daily during gestation for hypertension, with the last dose taken 20 hours before delivery. A single sample of breastmilk obtained 38 hours postpartum (58 hours after the last dose) was 146 mcg/L.[3]

After oral doses of 80 mg daily in 12 women, peak nadolol levels occurred in milk at an average of 6 hours after the dose, compared to peak serum levels at 2.7 hours. Serum and milk half-lives were both about 22 hours. Steady-state milk levels occurred after 3 days of therapy; peak milk levels averaged 443 mcg/L and the mean milk levels averaged 357 mcg/L. None of the infants were breastfed.[4,5]

Infant Levels. A mother with long-QT syndrome was taking nadolol 40 mg twice daily in the morning and evening during pregnancy and postpartum. While she was exclusively breastfeeding, on day 3 her infant had a serum nadolol concentration of 10 mcg/L (5.9% of the maternal serum concentration). On day 10 postpartum, her infant had a serum nadolol concentration of 19 mcg/L (13.4% of the maternal serum concentration). On day 17 postpartum, her infant had a serum nadolol concentration of 23 mcg/L (16.5% of the maternal serum concentration). On day 165 postpartum, while the mother was taking 80 mg of nadolol once daily, the infant’s serum nadolol concentration was < 2 mcg/L while the mother had a serum concentration of 84 mcg/L at 3 hours after the dose.[6]

### Effects in Breastfed Infants

A study of mothers taking beta-blockers during nursing found a numerically, but not statistically significantly increased number of adverse reactions in those taking any beta-blocker. Although the ages of infants were matched to control infants, the ages of the affected infants were not stated. None of the mothers were taking nadolol.[7]

A prospective study of pregnant patients taking a beta-blocker asked mothers to complete a questionnaire about postpartum breastfeeding and any side effects in their breastfed infants. Two mothers reported taking nadolol in unreported dosages while breastfeeding. Neither reported any adverse reactions in their breastfed infants; both had breastfed during nadolol therapy in a previous pregnancy.[8] One of the mothers had a long-QT syndrome and was taking nadolol 40 mg twice daily in the morning and evening during pregnancy and postpartum. She had successfully and safely breastfed her prior infant who also had long-QT syndrome and was taking nadolol also. In her second pregnancy, she delivered a normal, full-term infant who was exclusively breastfed from birth until 4.5 months postpartum when mixed feeding was started. At 2 months postpartum, the nadolol dosage was changed to 80 mg once daily after the morning feed. Electrocardiograms were performed at birth, day 3, and day 5. Blood glucose, blood pressure, and heart rate were measured on days 10 and 17. The initial neonatal ECG showed a prolonged QTc interval, which normalized by day 3. Genetic testing excluded congenital long QT syndrome in the infant. On day 10, the infant’s blood glucose level was 1.32 g/L, blood pressure was 70/41 mmHg with a mean of 53 mmHg, and the heart rate was 140 bpm. On day 17, the infant’s blood glucose level was 1.13 g/L, the blood pressure was 69/31 mmHg with a mean of 43 mmHg, and the heart rate was 131 bpm. No adverse cardiac, metabolic, or developmental effects occurred during the 6 months of breastfeeding.[6]

### Effects on Lactation and Breastmilk

Relevant published information on the effects of beta-blockade or nadolol during normal lactation was not found as of the revision date. A study in 6 patients with hyperprolactinemia and galactorrhea found no changes in serum prolactin levels following beta-adrenergic blockade with propranolol.[9]

### Alternate Drugs to Consider

Propranolol, Labetalol, Metoprolol

### References

1 Riant P, Urien S, Albengres E, et al. High plasma protein binding as a parameter in the selection of betablockers for lactating women. Biochem Pharmacol 1986;35:4579-81 2878668
2 Atkinson HC, Begg EJ, Darlow BA. Drugs in human milk: Clinical pharmacokinetic considerations. Clin Pharmacokinet 1988;14:217-40 3292101
3 Fox RE, Marx C, Stark AR. Neonatal effects of maternal nadolol therapy. Am J Obstet Gynecol 1985;152:1045-6 4025452
4 Devlin RG, Duchin KL, Fleiss PM. Nadolol in human serum and breast milk. Br J Clin Pharmacol 1981;12:393-6 6117304
5 Devlin RG, Fleiss PM. Nadolol excretion in human milk. Clin Pharmacol Ther 1981;29:240.doi:10.1038/clpt.1981.37
6 Freppel R, Gaboriau L, Mestdagh B, et al. Breastfeeding during maternal nadolol therapy for long QT syndrome: Five-month infant follow-up. Pediatr Cardiol 2025 41335236
7 Ho TK, Moretti ME, Schaeffer JK, et al. Maternal beta-blocker usage and breast feeding in the neonate. Pediatr Res 1999;45 (4, pt. 2):67A.doi:10.1203/00006450-199904020-00402
8 Freppel R, Gaboriau L, Richardson M, et al. Beta-blockers and breastfeeding: A real-life prospective study. Eur J Clin Pharmacol 2024;80:1937-43 39259357
9 Board JA, Fierro RJ, Wasserman AJ, et al. Effects of alpha- and beta-adrenergic blocking agents on serum prolactin levels in women with hyperprolactinemia and galactorrhea. Am J Obstet Gynecol 1977;127:285-7 556882

## Substance Identification

### Substance Name

Nadolol

### CAS Registry Number

42200-33-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antihypertensive Agents

Adrenergic Beta-Antagonists

Antiarrhythmics